# Ingenol Mebutate

CASRN: 75567-37-2

## Drug Levels and Effects

### Summary of Use during Lactation

Topical ingenol mebutate has not been studied during breastfeeding. However, after topical administration, serum concentrations were undetectable, so breastfeeding is not expected to result in exposure of the breastfed infant. If ingenol mebutate is required by the mother, it is not a reason to discontinue breastfeeding. Do not apply ingenol mebutate to the breast or nipple and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. According to the manufacturer, serum concentrations of ingenol mebutate and its two metabolites are below the limit of detection (<0.1 mcg/L) after topical application of approximately 1 gram of 0.05% gel to an area of 100 sq. cm.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ingenol Mebutate

### CAS Registry Number

75567-37-2

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Dermatologic Agents